# Ulipristal

CASRN: 159811-51-5

## Drug Levels and Effects

### Summary of Use during Lactation

Ulipristal is a selective progesterone receptor modulator used in a single dose as an emergency postcoital contraceptive. No information is available on the clinical use of ulipristal during breastfeeding; however, amounts in milk are low. If ulipristal is required by the mother, it is not a reason to discontinue breastfeeding. Some older sources recommend withholding breastfeeding for 24 hours after a dose,[1] but this is no longer a requirement according to current FDA-approved labeling.

### Drug Levels

Ulipristal acetate is metabolized to mono- and di-demethylated metabolites by CYP3A4. Monodemethyl-ulipristal is pharmacologically active.

Maternal Levels. The breastmilk of 12 lactating women following administration of ulipristal (dosage not stated, but presumably 30 mg) was collected in 24-hour increments to measure the concentrations of ulipristal acetate and monodemethyl-ulipristal acetate in breastmilk. The mean daily concentrations of ulipristal acetate in breastmilk were 22.7 mcg/L (0 to 24 hours), 2.96 mcg/L (24 to 48 hours), 1.56 mcg/L (48 to 72 hours), 1.04 mcg/L (72 to 96 hours), and 0.69 mcg/L (96 to 120 hours). The mean daily concentrations of monodemethyl-ulipristal acetate in breastmilk were 4.49 mcg/L (0 to 24 hours), 0.62 mcg/L (24 to 48 hours), 0.28 mcg/L (48 to 72 hours), 0.17 mcg/L (72 to 96 hours), and 0.10 mcg/L (96 to 120 hours). Using these data, a fully breastfed infant would receive about 4.1 mcg/kg of drug plus active metabolite on the first day and a total of 5.2 mcg/kg over 5 days).[2] Assuming a 30 mg dose and an average maternal weight of 60 kg, the infant would receive a weight-adjusted dosage of 0.8% of drug plus active metabolite on the first day and a total of 1% of the maternal dose over the 5-day period.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Intrauterine Copper Contraceptive, Oral Levonorgestrel

### References

1 Curtis KM, Jatlaoui TC, Tepper NK, et al. U.S. selected practice recommendations for contraceptive use, 2016. MMWR Recomm Rep 2016;65:1-66.27467319
2 Afaxys Inc. Ella Package Insert. January 27, 2020.

## Substance Identification

### Substance Name

Ulipristal

### CAS Registry Number

159811-51-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Contraceptive Agents

Contraceptives, Postcoital

Contraceptive Agents, Female